# Tranexamic Acid

CASRN: 1197-18-8

## Drug Levels and Effects

### Summary of Use during Lactation

Amounts of tranexamic acid in breastmilk appear to be low. Recent expert opinion considers that breastfeeding should be permitted in infants whose mothers require treatment with tranexamic acid.[1,2] Tranexamic acid is used for hereditary angioedema in low-income countries where first-line treatments are not available, but should not be used if C1-INH is available.[3]

### Drug Levels

Maternal Levels. Unpublished data from the manufacturer indicates that the concentration of tranexamic acid in breastmilk is 1% of the peak serum concentration 1 hour after the last dose of a 2-day treatment course.[4] Further details of the study have not been published.

A dose-finding study of 30 women who received either 5, 10 or 15 mg/kg of tranexamic acid at the time of cord clamping after cesarean delivery collected convenience samples of milk at unspecified times when mothers were nursing their neonates. Tranexamic acid levels in milk were measured in 7 patients. Three samples had no detectable tranexamic acid (<0.04 mg/L). The other samples contained tranexamic acid concentrations ranging from 0.06 to 0.47 mg/L.[5]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Twenty-one mothers who took tranexamic acid during breastfeeding were compared to 42 mothers who took amoxicillin during breastfeeding. In the study population, the tranexamic acid dosage ranged between 1.5 and 4 grams daily at an average of 4.2 months of age and 81% exclusively breastfed their infants. The average time of follow-up of the infants of study mothers was 35.7 months of age. No statistically significant difference were found between the study and control groups in possible drug side effects, neurological development or general health.[6]

A randomized, double-blind, multicenter study compared the use of a 1 gram dose of intravenous tranexamic acid (n = 10,051) to placebo (n = 10,009) in women with postpartum hemorrhage. The dose could be repeated in 24 hours if bleeding recurred. Among babies who were breastfed, no difference in infant deaths were seen between the two groups, nor were any thromboembolic events reported. The numbers of breastfed infants in each group were not reported.[7]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 James AH, Pacheco LD, Konkle BA. Management of pregnant women who have bleeding disorders. Hematology Am Soc Hematol Educ Program 2023;2023:229–36.38066866
2 Vázquez DO, Giavina-Bianchi P, Josviack D, et al. The 2025 WAO Guidelines for the classification, diagnosis, and treatment of hereditary angioedema, with consideration of worldwide disparities. World Allergy Organ J 2026;19:101335.42165046
3 Yeich A, Elhatw A, Ashoor Z, et al. Safety of medications for hereditary angioedema during pregnancy and lactation. Expert Opin Drug Saf 2023;22:17–24.36744397
4 Verstraete M. Clinical application of inhibitors of fibrinolysis. Drugs 1985;29:236–61.2580684
5 Ahmadzia HK, Luban NLC, Li S, et al. Optimal use of intravenous tranexamic acid for hemorrhage prevention in pregnant women. Am J Obstet Gynecol 2021;225:e1–11.33248975
6 Gilad O, Merlob P, Stahl B, et al. Outcome following tranexamic acid exposure during breastfeeding. Breastfeed Med 2014;9:407–10.25025926
7 Shakur H, Roberts I, Fawole B, et al. Effect of early tranexamic acid administration on mortality, hysterectomy, and other morbidities in women with post-partum haemorrhage (WOMAN): An international, randomised, double-blind, placebo-controlled trial. Lancet 2017;389:2105–16.28456509

## Substance Identification

### Substance Name

Tranexamic Acid

### CAS Registry Number

1197-18-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antifibrinolytic Agents